# Ginkgo

CASRN: 90045-36-6

## Drug Levels and Effects

### Summary of Use during Lactation

Ginkgo (Ginkgo biloba) leaf contains flavonoids (e.g., quercetin, kaempferol, isorhamnetine) and several terpene trilactones (e.g., ginkgolides, bilobalide) as well as numerous minor components. Standardization is based on ginkgo flavone glycoside and terpenoid content. Raw ginkgo seeds contain potentially toxic cyanogenic glycosides and should not be used; roasted seeds do not carry this risk. Ginkgo has no specific uses during breastfeeding, but is commonly used as an antioxidant, a vasodilator to increase cerebral and peripheral perfusion, and to improve memory. No data exist on the safety and efficacy of ginkgo in nursing mothers or infants. In general, it is well tolerated, but occasionally minor symptoms (e.g., headache, nausea, gastrointestinal complaints, allergic skin rashes) occur in those taking the drug. Ginkgo has caused some cases of bleeding in healthy volunteers caused by its antiplatelet activity. Because there is no published experience with ginkgo during breastfeeding, an alternate therapy may be preferred, especially while nursing a newborn or preterm infant.[1]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

No components of Ginkgo biloba have been measured in milk after its ingestion, but some have been measured after the ingestion of other foods. Quercetin can be found in breastmilk of mothers with normal diets.[2]

Maternal Levels. Milk samples from 17 nursing mothers on uncontrolled diets were taken at 1, 4 and 13 weeks postpartum at times between 10 am and 1 pm. Average quercetin levels in breastmilk were 48 nmol/L at week 1, 60 nmol/L at week 4 and 51 nmol/L at week 13. Kaempferol concentrations ranged from 7.8 to 71.4 nmol/L, increasing from weeks 1 to 13 (and from weeks 4 to 13. Because of the uncontrolled diet and varying sampling times, the range of values among individuals was large.[3]

Quercetin was measured in the milk of 11 mothers after they received an onion soup that contained either 0.8 or 1 mg/kg of quercetin glucosides. A baseline milk sample was obtained after a 5-day low-quercetin diet, and 7 milk samples were obtained over the 48 hours following soup ingestion. Baseline total (from conjugated and unconjugated) quercetin in breastmilk averaged 45 nmol/L. An average peak milk quercetin level of 68 nmol/L was attained at an average of 11.9 hours after the soup meal. The average half-life of quercetin in breastmilk was 50.3 hours.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Amir LH, Pirotta MV, Raval M. Breastfeeding - Evidence based guidelines for the use of medicines. Aust Fam Physician 2011;40:684-90.21894275
2 Williamson G, Clifford MN. A critical examination of human data for the biological activity of quercetin and its phase-2 conjugates. Crit Rev Food Sci Nutr 2025;65:1669-705.38189312
3 Song BJ, Jouni ZE, Ferruzzi MG. Assessment of phytochemical content in human milk during different stages of lactation. Nutrition 2013;29:195-202.23237648
4 Romaszko E, Wiczkowski W, Romaszko J, et al. Exposure of breastfed infants to quercetin after consumption of a single meal rich in quercetin by their mothers. Mol Nutr Food Res 2014;58:221-8.23963751

## Substance Identification

### Substance Name

Ginkgo

### CAS Registry Number

90045-36-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal